# Chamomile

CASRN: 8002-66-2

## Drug Levels and Effects

### Summary of Use during Lactation

Two different plant species with similar effects are known as chamomile: German chamomile (Matricaria recutita) and Roman chamomile (Chamaemelum nobile). Both contain similar ingredients, including sesquiterpenes (e.g., bisabolol, farnesene), sesquiterpenelactones (e.g., chamazulene, matricin), flavonoids (e.g., apigenin, luteolin), and volatile oils. Chamomile is used orally as a sedative and for gastrointestinal conditions; it is used topically for wound healing. Both herbal and homeopathic preparations have been used to treat mastitis and cracked, bleeding nipples.[1,2] Chamomile has been used as a galactogogue;[3,4] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6]

Chamomile is "generally recognized as safe" (GRAS) for use in food by the U.S. Food and Drug Administration as a spice, seasoning, or flavoring agent. No data exist on the safety of chamomile in nursing mothers or infants, although rare sensitization may occur (see below).[7] It has been safely and effectively used alone and with other herbs in infants for the treatment of colic, diarrhea, and other conditions,[8-11] so the smaller amounts expected (but not demonstrated) in breastmilk are likely not to be harmful with usual maternal doses. Note that Clostridium botulinum (botulism) spores have been found in some loose-leaf chamomile teas sold in health food stores.

Topical chamomile is a known sensitizing agent, even with homeopathic products.[12] Two women developed contact dermatitis of the nipples and areolas after applying Kamillosan ointment for cracked nipples. The product was purchased in England and contained 10.5% Roman chamomile extracts and oil. Reactions were confirmed to be caused by Roman chamomile by patch testing in both women. Drinking chamomile tea can exacerbate topical skin rashes and has caused anaphylaxis in sensitized individuals.[13] Chamomile has possible cross-reactivity with other members of the aster family (e.g., echinacea, feverfew, and milk thistle).[7]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A mother nursing her 3-month-old infant began drinking 1.5 to 2 L daily of a chamomile infusion made by pouring 1.5 L of hot water over 1 to 3 grams of chamomile flowers. Each time after drinking the infusion, she noticed fullness and tenderness of the breasts 4 to 6 hours later. She also found that she was able to pump 90 mL of milk after chamomile use, compared to 60 mL without chamomile use. During this time she was also mildly hypothyroid.[4]

### References

1 Castro M. (1999). Homeopathy. A theoretical framework and clinical application. J Nurse Midwifery.
2 Nayeri SD, Kheirkhah M, Janani L. (2019). The effect of chamomile ointment on the healing of breastfeeding mothers' nipple sore-a randomized controlled clinical trial. J Evolution Med Dent Sci.
3 Boies EG, Vaucher YE, Willies-Jacobo L, et al. Use of foods, herbs and teas by Latina mothers to enhance breastfeeding. Pediatr Res 2004;4 (Suppl. S, Part 2):213A.
4 Silva FV, Dias F, Costa G, et al. (2018). Chamomile reveals to be a potent galactogogue: The unexpected effect. J Matern Fetal Neonatal Med.
5 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
6 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
7 O'Hara M, Kiefer D, Farrell K, et al. (1998). A review of 12 commonly used medicinal herbs. Arch Fam Med.
8 Weizman Z, Alkrinawi S, Goldfarb D, et al. (1993). Efficacy of herbal tea preparation in infantile colic. J Pediatr.
9 Savino F, Cresi F, Castagno E, et al. (2005). A randomized double-blind placebo-controlled trial of a standardized extract of Matricariae recutita, Foeniculum vulgare and Melissa officinalis (ColiMil) in the treatment of breastfed colicky infants. Phytother Res.
10 Zhang Y, Fein EB, Fein SB. (2011). Feeding of dietary botanical supplements and teas to infants in the United States. Pediatrics.
11 Wojcicki JM, Holbrook K, Lustig RH, et al. (2011). Infant formula, tea, and water supplementation of Latino infants at 4-6 weeks postpartum. J Hum Lact.
12 Barankin B, Gross MS. (2004). Nipple and areolar eczema in the breastfeeding woman. J Cutan Med Surg.
13 McGeorge BC, Steele MC. (1991). Allergic contact dermatitis of the nipple from Roman chamomile ointment. Contact Dermatitis.

## Substance Identification

### Substance Name

Chamomile

### Scientific Name

Matricaria recutita; Chamaemelum nobile

### CAS Registry Number

8002-66-2

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal